# Pitolisant

CASRN: 362665-56-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of pitolisant during breastfeeding. However, amounts in breastmilk appear to be low and would not be expected to cause any adverse effects in breastfed infants. If pitolisant is required by the mother, it is not a reason to discontinue breastfeeding. Until more safety data are available, pitolisant should be used with careful infant monitoring during breastfeeding.

### Drug Levels

Maternal Levels. The manufacturer reports an open-label study in 8 healthy lactating women who were 11 to 96 weeks post-partum. Breastmilk samples were collected over 24 hours after a single dose of 35.6 mg of pitolisant. Pitolisant had a mean peak milk concentration of 47.5 mcg/L with about 50% of the amount of pitolisant measured in breastmilk found during the first 4 hours after the maternal dose. The mean infant dosage of pitolisant was calculated to be 0.009 mg daily, which represented a mean relative infant dose of 0.56% of the maternal weight-adjusted dosage.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Narcolepsy) Amphetamine, Armodafinil, Dextroamphetamine, Lisdexamfetamine, Methylphenidate, Modafinil

## Substance Identification

### Substance Name

Pitolisant

### CAS Registry Number

362665-56-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Histamine H3 Antagonists

Wakefulness-Promoting Agents